# Danicopan

CASRN: 1903768-17-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of danicopan during breastfeeding. Because danicopan is more than 91% bound to plasma proteins, the amount in milk is likely to be low. However, the manufacturer recommends avoiding breastfeeding during use and for 3 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Danicopan

### CAS Registry Number

1903768-17-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement Inactivating Agents